# Lavender

CASRN: 8000-28-0

## Drug Levels and Effects

### Summary of Use during Lactation

Lavender (Lavendula angustifolia) flowers, leaves and oil contain linaloyl acetate, linalool, perillyl alcohol, 1,8 cineole (eucalyptol), and at least 100 other known compounds. Lavender has no specific lactation-related uses. Lavender preparations have traditionally been used for anxiety, insomnia and other neurologic conditions, infections, pain and a variety of other conditions, often as aromatherapy. A meta-analysis of 3 randomized, controlled trials concluded that lavender in different formats (aromatherapy, cream, tea) had a positive effect improving sleep quality in postpartum mothers.[1] Lavender is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. In general, lavender is well tolerated, but no data exist on the safety and efficacy of lavender in nursing mothers or infants. Lavender oil has estrogenic and antiandrogenic activity, so topical application around the breast should be avoided.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[2]

Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[3,4]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 34.6 mg of linalool. Baseline linalool concentrations in milk averaged 0.22 mcg/L (range 0 to 1.1 mcg/L). Milk samples contained linalool in concentrations of 0.12 to 15.24 mcg/L at 1 hour after eating, 0.03 to 6.44 mcg/L at 2 hours after eating and 0.01 to 3.73 mcg/L at 3 hours after eating. In the same study, the curry dish contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[5]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole and 35 mg of linalool. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L. Linalool reached its maximum concentration in milk after 1 hour in eleven participants, after 2 hours in six, after 3 hours in two participants, while in one participant, the maximum was not clearly determinable. Peak milk linalool concentrations ranged from 4.13 to 18.91 mcg/L. Linalool concentrations averaged 40% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated linalool into milk.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and "looked puzzled", but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[2]

### Effects on Lactation and Breastmilk

Gynecomastia occurred in 3 prepubertal boys who were using grooming products containing lavender oil. The gynecomastia resolved after the products were discontinued. In vitro testing found that lavender oil possesses mild estrogenic and antiandrogenic activity.[7] The relevance of these finding has been questioned,[8,9] but no further testing has been reported to confirm or refute the findings as of the revision date.

### References

1 Seiiedi-Biarag L, Mirghafourvand M. The effect of lavender on mothers sleep quality in the postpartum period: A systematic review and meta-analysis. J Complement Integr Med 2022;20:513-20.35080353
2 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682-92.22405404
3 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47-71.24957890
4 Kirsch F, Horst K, Rohrig W, et al. Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47-71. doi:10.1007/s11306-012-0466-9
5 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
6 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
7 Henley DV, Lipson N, Korach KS, et al. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:479-85.17267908
8 Kalyan S. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2542-4.17575592
9 Kemper KJ, Romm AJ, Gardiner P. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2541-4.17568039

## Substance Identification

### Substance Name

Lavender

### Scientific Name

Lavendula angustifolia

### CAS Registry Number

8000-28-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal